# Rifabutin

CASRN: 72559-06-9

## Drug Levels and Effects

### Summary of Use during Lactation

The amount of rifabutin in milk is insufficient to treat tuberculosis in the breastfed infant. The Centers for Disease Control and Prevention and other professional organizations state that breastfeeding should not be discouraged in women taking rifabutin.[1-3] Monitor the infant for signs of liver toxicity. Breastmilk may be stained a brown-orange color.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Rifampin, Rifapentin

### References

1 Blumberg HM, Burman WJ, Chaisson RE, et al. (2003). American Thoracic Society/Centers for Disease Control and Prevention/Infectious Diseases Society of America: treatment of tuberculosis. Am J Respir Crit Care Med.
2 Anon. (2003). Treatment of tuberculosis. MMWR Recomm Rep.
3 Bartlett JG. (2002). Guidelines section. Infect Dis Clin Pract.

## Substance Identification

### Substance Name

Rifabutin

### CAS Registry Number

72559-06-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents

Leprostatic Agents

Rifamycins